# Dengue Tetravalent Vaccine, Live

## Drug Levels and Effects

### Summary of Use during Lactation

Dengue vaccine is a live, attenuated vaccine indicated for children up to 16 years of age. No information is available on the clinical use of dengue vaccine during breastfeeding. However, the viruses were not detected in the milk of rats given the vaccine. If the mother requires dengue vaccine, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dengue Tetravalent Vaccine, Live

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines